# Linezolid

CASRN: 165800-03-3

## Drug Levels and Effects

### Summary of Use during Lactation

Linezolid is excreted into breastmilk in concentrations likely to be effective against staphylococcal strains found in mastitis.[1-3] Limited data indicate that the maximum dose an infant would receive through breastmilk would be only 6 to 9% of the standard infant dose and that resulting infant serum levels are trivial. If the mother requires linezolid, it is not a reason to discontinue breastfeeding. Monitor the infant for possible effects on the gastrointestinal tract, such as diarrhea and vomiting.

### Drug Levels

Maternal Levels. A 32-year-old lactating woman was given a single dose of 600 mg of linezolid orally. Milk samples were taken at 10 time points over the next 24 hours. The peak concentration of linezolid in breastmilk occurred 2 hours after the dose with a value of 12.4 mg/L. Milk concentrations fell with a half-life of 6.5 hours and were detectable up to 24 hours after the dose.[2] Using the peak milk level data from this patient, an exclusively breastfed infant would receive an estimated maximum of about 2 mg/kg daily with the maximum recommended maternal dosage. The established maximum dosage of linezolid for infants is 30 mg/kg daily.

A woman was given oral linezolid 600 mg every 12 hours for methicillin-resistant Staph. aureus mastitis. She pumped milk from both breasts 8 times daily on days 1 and 14 of therapy. Peak breastmilk linezolid levels were 9.75 mg/L on day 1 and 18.73 mg/L on day 14. The authors calculated that a fully breastfed infant would receive 7.85% of the weight-adjusted maternal dosage on day 1 and 15.61% on day 14. Using the average milk level on day 14, a fully breastfed infant would receive a dosage of 1.84 mg/kg daily, which is less than the maximum dosage of linezolid for infants of 30 mg/kg daily.[3]

A woman taking linezolid 600 mg orally every 12 hours donated breastmilk samples at various times over a 24 hour period after about 45 hours after the first dose. Breastmilk linezolid levels ranged from 3.5 to 12.2 mg/L, with the highest level shortly after a dose and the lowest shortly before the following dose.[4]

Infant Levels. A random blood sample was taken from a breastfed (extent not stated) infant about 3 to 4 hours after a maternal dose and found to contain <0.2 mg/L of linezolid, although the time of the previous breastfeeding was not known. A breast milk sample obtained 1 hour after the infant's serum sample and 4 hours after linezolid administration was 8.9 mg/L.[4]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-resistant Staph. aureus) Doxycycline, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Delgado S, Arroyo R, Jimenez E, et al. Staphylococcus epidermidis strains isolated from breast milk of women suffering infectious mastitis: Potential virulence traits and resistance to antibiotics. BMC Microbiol 2009;9:82 19422689
2 Sagirli O, Onal A, Toker S, et al. Determination of linezolid in human breast milk by high-performance liquid chromatography with ultraviolet detection. J AOAC Int 2009;92:1658-62 20166583
3 Rowe HE, Felkins K, Cooper SD, et al. Transfer of linezolid into breast milk. J Hum Lact 2014;30:410-2 25098610
4 Lim FH, Lovering AM, Currie A, et al. Linezolid and lactation: Measurement of drug levels in breast milk and the nursing infant. J Antimicrob Chemother 2017;72:2677-8 28541475

## Substance Identification

### Substance Name

Linezolid

### CAS Registry Number

165800-03-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Anti-Bacterial Agents